# Cyanocobalamin Co 57

CASRN: 13115-03-2

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of cyanocobalamin Co 57 as a diagnostic agent. Limited data indicate that excretion of radioactivity into breastmilk following cyanocobalamin Co 57 is low and does not require withholding of breastfeeding after diagnostic use. However, to minimize the radiation dose to the infant, some authors suggest that previously saved milk could be substituted for one feeding at about 24 hours after the dose.[1]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[2]

### Drug Levels

Co 57 decays by electron capture with a physical half-life of 271.79 days.

Maternal Levels. A woman who was 3 weeks postpartum was given oral cyanocobalamin Co 57 in a dose of 18.6 kBq, followed by an intravenous dose of unlabeled cyanocobalamin as part of the Schilling test. Milk samples were collected 6 times during the first 25 hours, then at 49 and 73 hours after the dose. Peak milk radioactivity occurred between 17 and 25 hours, with levels of 0.25 to 0.26 Bq/mL. The woman was found to have some cyanocobalamin malabsorption, so the milk levels may have been lower than in a mother with unimpaired absorption.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pomeroy KM, Sawyer LJ, Evans MJ. Estimated radiation dose to breast feeding infant following maternal administration of 57Co labelled to vitamin B_12_. Nucl Med Commun 2005;26:839-41.16096589
2 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Cyanocobalamin Co 57

### CAS Registry Number

13115-03-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Diagnostic Agents

Radiopharmaceuticals

Diagnostic Agents